# Selumetinib

CASRN: 606143-52-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of selumetinib during breastfeeding. Because selumetinib is 98% bound to plasma proteins, the amount in milk is likely to be low. However, because of its potential toxicity in the breastfed, the manufacturer recommends that breastfeeding be discontinued during selumetinib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Selumetinib

### CAS Registry Number

606143-52-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Tyrosine Kinase Inhibitors

Signal Transduction Inhibitors

MEK Inhibitors